# Niclosamide

CASRN: 50-65-7

## Drug Levels and Effects

### Summary of Use during Lactation

Niclosamide is not marketed in the United States. No information is available on the clinical use of niclosamide during breastfeeding. Because niclosamide is not orally absorbed it is unlikely to adversely affect the breastfed infant. No special precautions are necessary.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Niclosamide

### CAS Registry Number

50-65-7

### Drug Class

Breast Feeding

Lactation

Anti-infective Agents

Antiparasitic Agents

Anthelmintics

Anticestodal Agents

Antinematodal Agents

Molluscacides